# Fosfomycin

CASRN: 23155-02-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that fosfomycin produces low levels in milk and is unlikely to be absorbed well by the infant because of the binding to calcium in the milk.[1] It is unlikely to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. After 1 to 2 grams of fosfomycin given by injection, colostrum levels in 2 women were 4.8 mg/L and milk levels were 3.6 mg/L.[2,3] Further details of the studies were not given.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciprofloxacin, Levofloxacin, Nitrofurantoin, Trimethoprim

### References

1 Lebedevs T. Fosfomycin and breastfeeding. Aust Prescr 2020;43:113. doi:10.18773/austprescr.2020.042 32921885
2 Gallego A, Rodríguez A, Mata A. Fosfomycin: pharmacological studies. Drugs Today (Barc) 1974;10 (Suppl 1):161-8.
3 Kirby WM. Pharmacokinetics of fosfomycin. Chemotherapy 1977;23 Suppl 1:141-51.832510

## Substance Identification

### Substance Name

Fosfomycin

### CAS Registry Number

23155-02-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibacterial Agents

Anti-Infective Agents, Urinary